# Apazone

CASRN: 13539-59-8

## Drug Levels and Effects

### Summary of Use during Lactation

Apazone (azapropazone) is not approved for marketing in the United States by the U.S. Food and Drug Administration. Relatively small amounts of the drug are excreted into breastmilk; however, the toxicity of the drug limits its usefulness in nursing mothers.[1] An alternate drug is preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Four women received apazone 600 mg intravenously within 2 hours postpartum, then twice daily for 5 to 10 days. Apazone was measured in the blood and breastmilk twice between days 4 and 6 postpartum at 4, 8 and 12 hours after the morning dose. The authors calculated that and average of 0.8 mg (range 0.2 to 1.3 mg) of apazone was excreted in milk over a 12-hour dosage interval.[2] Using reported infant and maternal body weights, a fully breastfed infant would receive an average of 2.13% (range 1.04 to 3.03%) of the mother’s weight-adjusted dosage.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Analgesia) Acetaminophen, Celecoxib, Diclofenac, Flurbiprofen, Ibuprofen, Indomethacin, Naproxen, Piroxicam; (Hyperuricemia) Probenecid

### References

1 Spigset O, Hägg S. Analgesics and breast-feeding: Safety considerations. Paediatr Drugs 2000;2:223–38.10937472
2 Bald R, Bernbeck-Betthauser EM, Spahn H, . Excretion of azapropazone in human breast milk. Eur J Clin Pharmacol 1990;39:271–3.2257865

## Substance Identification

### Substance Name

Apazone

### CAS Registry Number

13539-59-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Inflammatory Agents, Nonsteroidal

Uricosuric Agents